# Ritlecitinib

CASRN: 1792180-81-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of ritlecitinib during breastfeeding. Because of the risk of serious adverse effects, including malignancy, the manufacturer recommends that breastfeeding be discontinued during ritlecitinib therapy and for 14 hours after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Ritlecitinib

### CAS Registry Number

1792180-81-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzyme Inhibitors

Janus Kinase Inhibitors

JAK Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors